# Progesterone

CASRN: 57-83-0

## Drug Levels and Effects

### Summary of Use during Lactation

Because of the low reported levels of progesterone in breastmilk, even with the high-dose products, amounts ingested by the infant are small and would not be expected to cause any adverse effects in breastfed infants. The progesterone vaginal ring available outside the US produces maternal blood levels that are lower than those of ovulating women. Expert opinion holds that the risks of progestin-only contraceptive products usually are acceptable for nursing mothers at any time postpartum.[1,2]

In Russia, a progesterone gel (Progestogel, Besins Healthcare; not available in the US) has been used topically as a one-time application to the breasts to treat postpartum breast engorgement when more conservative measures have failed.[3] A subsequent study failed to detect any decrease in breast hardness 20 minutes after application of progesterone gel in mothers with engorgement.[4] The safety and efficacy of this use have not been well studied and the manufacturer of Progestogel recommends avoiding its use during lactation.

### Drug Levels

Maternal Levels. Women who received 6 subdermal implants containing 100 mg each of progesterone between days 30 to 35 postpartum for contraception had milk progesterone levels measured. Milk progesterone levels were 5.7 mcg/L in 6 women at 3 to 4 months postpartum and 6.3 mcg/L in 7 women at 9 to 12 months postpartum. By comparison, 9 women who received a Copper T intrauterine device had negligible progesterone levels. The authors estimated that infants would receive about 5 mcg of progesterone daily through breastmilk.[5,6]

Infant Levels. Women received 6 subdermal implants containing 100 mg each of progesterone between days 30 to 35 postpartum for contraception. A metabolite of progesterone, pregnane-3-glucuronide, was measured in the urine of their infants. At 3 to 4 months (n = 9) and 9 to 12 months (n = 7) postpartum, urine metabolite levels were 6.3 mcg/L and 15.7 mcg/L, respectively. These values were not significantly different from those of infants whose mothers were using a Copper T intrauterine device.[5,6]

### Effects in Breastfed Infants

Eighty-four women had 6 subdermal implants containing 100 mg each of progesterone inserted between days 30 to 35 postpartum as a contraceptive. Compared to women who received either a placebo or a Copper T intrauterine device, there were no differences in the growth rates of their infants over the first 6 months postpartum.[7]

One hundred ninety-two mothers who received 6 subdermal implants containing 100 mg each of progesterone inserted on postpartum day 60 as a contraceptive. The weight gain of 60 infants who were exclusively breastfed for 6 months was compared to that of infants whose mothers received either placebo (n = 68 at day 30) or a Copper T (n = 64 at day 30 and n = 49 at day 60) intrauterine device. No differences were found in the average weight gains among the 3 groups of infants at 6 months of age.[8]

Vaginal rings that released progesterone were inserted at about 60 days postpartum in 128 women. The 2 types of rings released progesterone either 7.5 mg daily decreasing to 4.5 mg at 90 days or 15 mg daily decreasing to 7 mg daily at 90 days. Over the first 12 months postpartum, no differences in weight gain were found between the exclusively breastfed infants of mothers who received the progesterone rings and control mothers who received a Copper T intrauterine device for contraception.[9]

One hundred twenty breastfeeding women used a vaginal ring that released about 10 mg daily of progesterone for 90 days, starting during weeks 5 to 7 postpartum. No differences were found in the growth of breastfed infants or in developmental milestones compared to the normal population values.[10]

One hundred eighty-seven breastfeeding women used a vaginal ring that released about 10 mg daily of progesterone, starting at about day 57 postpartum. No differences were found in weight gain during the first 6 months of use compared to infants whose mothers received either a Copper T intrauterine device, an oral progestin-only contraceptive or levonorgestrel implant.[11]

A study comparing 100 women who received vaginal ring that released about 10 mg daily of progesterone to those who received a Copper T intrauterine device between days 29 and 64 postpartum found no differences in weight gain of their breastfed infants over the first year postpartum.[12]

Two hundred eighty-five women who received a vaginal ring that released about 10 mg daily of progesterone were compared to 262 women who received a Copper T intrauterine device beginning between weeks 5 and 9 postpartum. No differences in the weight gain of breastfed infants were seen between the 2 groups during the 14-month observation period.[13]

A study comparing progesterone ring (n = 459) to the copper-T IUD (n = 330) in postpartum women found no adverse effects on infant breastfeeding or growth.[14]

### Effects on Lactation and Breastmilk

Eighty-four women had 6 subdermal implants containing 100 mg each of progesterone inserted between days 30 to 35 postpartum as a contraceptive. Compared to women who received either a placebo or a Copper T intrauterine device, no difference was found in the breastfeeding rates during the first 9 months postpartum. At 1 year postpartum, more women in the Copper T group were breastfeeding than in the progesterone or placebo groups.[7]

Vaginal rings that released progesterone were inserted at about 60 days postpartum in 246 women. The 3 types of rings released progesterone, either 5, 10 or 15 mg daily. Control women received a Copper T intrauterine device. At 6 and 12 months postpartum there was no significant difference in the percentage of infants who were breastfed between the progesterone and Copper T groups.[15]

One hundred twenty breastfeeding women used a vaginal ring that released about 10 mg daily of progesterone, starting during weeks 5 to 7 postpartum. The rate of weaning was greater in the progesterone ring group than in groups of women who received levonorgestrel or norethindrone implants for postpartum contraception.[10]

In a multicenter study, 802 women who received a vaginal ring that released about 10 mg daily of progesterone were compared to 734 women who received a Copper T intrauterine device beginning at day 29 to 63 postpartum. No differences were found in the rate of breastfeeding between the 2 groups over the first year postpartum.[16]

Two hundred eighty-five women who received a vaginal ring that released about 10 mg daily of progesterone were compared to 262 women who received a Copper T intrauterine device beginning between weeks 5 and 9 postpartum. No differences in the breastfeeding rates were seen between the 2 groups during the 14-month observation period.[13]

An observational study followed 192 women who used a vaginal ring that released 10 mg of progesterone daily beginning between days 54 and 64 postpartum. All subjects used the vaginal ring for at least 4 months; 90% were still using it at 6 months and 73% were using it at 9 months postpartum. The duration of breastfeeding and infant growth were similar to reference groups.[17]

A double-blind placebo-controlled trial randomized 46 postpartum women who were abstinent former smokers to oral micronized progesterone 200 mg twice a day or placebo for 4 weeks to assess smoking abstinence rates. Entry into the study occurred only after breastfeeding was well established. No statistical difference was found in the number of days of breastfeeding between the groups.[18]

A study comparing progesterone ring (n = 459) to the copper-T IUD (n = 330) in postpartum women found that lactation amenorrhea lasted longer (405 days) with the progesterone ring than with the IUD (120 days).[14]

A transgender woman took and spironolactone 50 mg twice daily to suppress testosterone, domperidone 10 mg three times daily, increasing to 20 mg four times daily, oral micronized progesterone 200 mg daily and oral estradiol to 8 mg daily and pumped her breasts 6 times daily to induce lactation. After 3 months of treatment, estradiol regimen was changed to a 0.025 mg daily patch, and the progesterone dose was lowered to 100 mg daily. Two weeks later, she began exclusively breastfeeding the newborn of her partner. Breastfeeding was exclusive for 6 weeks, during which the infant's growth, development and bowel habits were normal. The patient continued to partially breastfeed the infant for at least 6 months.[19]

A transgender woman was taking spironolactone 100 mg twice daily, progesterone 200 mg daily and estradiol 5 mg daily. She was started on domperidone 10 mg three times daily to increase milk supply. She was able to pump 3 to 5 ounces of milk daily one month after starting. The dose of domperidone was increased to 30 mg three times daily after 8 weeks because of a decreased milk supply. Her milk supply returned to 3 to 5 ounces of milk daily. By 6 months, her milk supply had decreased to about 5 mL daily, even though her serum prolactin was still elevated.[20]

A transgender woman had been taking estradiol 2 mg twice daily for 14 years. She began taking domperidone 10 mg four times daily and progesterone 100 mg daily 107 days prior to her partner’s due date. At the same time, the estradiol dosage was increased to 4 mg twice daily. At 94 days prior to the due date, the domperidone dosage was increased to 20 mg four times daily, the progesterone dose was increased to 200 mg daily and estrogen was changed to transdermal estradiol 25 mcg daily. Progesterone was discontinued 34 days prior to the due date. She pumped and stored milk beginning at 34 days prior to the due date and by 27 days postpartum, she was breastfeeding the infant twice daily, expressing 150 mL of milk daily and was able to decrease the domperidone dosage to 20 mg three times daily. Lower dosages reduced milk supply.[21]

A transgender woman was taking sublingual estradiol 4 mg twice daily, spironolactone 100 mg twice daily and progesterone 200 mg at bedtime for gender-affirming therapy. In order to prepare for the birth of the infant being carried by her partner, sublingual estradiol was increased to 6 mg twice daily and progesterone was increased to 400 mg at bedtime. Domperidone 10 mg twice daily was also started to increase serum prolactin levels and later increased to 20 mg 4 times daily. Before the delivery date, progesterone was stopped, spironolactone was decreased to 100 mg daily and estradiol was changed to 25 mcg per day transdermally. At day 59 postpartum, estradiol was changed to 2 mg per day sublingually and spironolactone was increased to 100 mg twice daily. The patient was able to produce up to 240 mL of milk daily containing typical macronutrient and oligosaccharide levels.[22]

A transgender woman who wished to breastfeed was given estradiol transdermal patch 150 mcg daily and progesterone 100 mg daily by mouth. Later estradiol spray 100 mcg and domperidone 10 mg 4 times daily were added. Domperidone dosage was then doubled to 20 mg 4 times daily and progesterone was doubled to 100 mg twice daily. After further adjustment of estradiol and progesterone dosages, 7 mL of milk was produced with pumping, but 2 weeks after the infant’s birth, lactation induction was discontinued at the patient’s request.[23]

A 50-year-old transgender woman wished to breastfeed her grandchild was taking baseline treatment with estradiol 0.3 mg transdermal patch every 72 hours and micronized progesterone 200 mg oral once daily. To initiate lactation, her estradiol dose was increased to a 0.4 mg transdermal patch every 72 hours and nipple stimulation was initiated. Later the patient’s progesterone was increased to 300 mg daily and metoclopramide oral 10 mg three times daily was initiated. She lactated for a total of two weeks and nursed the four-month-old infant on multiple occasions. Her peak milk production was 30 mL from her larger right breast, and 8 mL from her smaller left breast.[24]

A 50-year-old transgender woman wished to breastfeed the expected infant of her partner. She was given progesterone in dosages increasing from 100 mg to 500 mg daily along with estradiol and domperidone to stimulate lactation. Progesterone was discontinued after 123 days of treatment. The patient was able to produce small quantities of milk and was able to directly breastfeed the infant.[25]

### Alternate Drugs to Consider

(Contraception) Etonogestrel, Intrauterine Copper Contraceptive, Levonorgestrel Implant, Intrauterine Levonorgestrel, Medroxyprogesterone Acetate

### References

1 World Health Organization. Medical Eligibility Criteria For Contraceptive Use: Sixth Ed. 2025. https://www.who.int/publications/i/item/9789240115583
2 Nguyen AT, Curtis KM, Tepper NK, et al. U.S. Medical Eligibility Criteria for Contraceptive Use, 2024. MMWR Recomm Rep 2024;73:1–126.39106314
3 Pustotina O. Management of mastitis and breast engorgement in breastfeeding women. J Matern Fetal Neonatal Med 2016;29:3121–5.26513602
4 Alekseev NP. Progesterone-containing gel does not eliminate postpartum breast engorgement? Breastfeed Med 2017;12:122–3.28170298
5 Croxatto HB, Díaz S. The place of progesterone in human contraception. J Steroid Biochem 1987;27:991–4.3320572
6 Croxatto HB, Díaz S, Peralta O, et al. Subdermal progesterone implants for fertility regulation in nursing women. In: Zatuchni G, Goldsmith A, Shelton J, Sciara J, eds. Long-acting contraceptive delivery systems. Philadelphia: Harper & Row; 1984:543–9.
7 Croxatto HB, Díaz S, Peralta O, et al. Fertility regulation in nursing women. II. Comparative performance of progesterone implants versus placebo and copper T. Am J Obstet Gynecol 1982;144:201–8.7114130
8 Díaz S, Peralta O, Juez G, et al. Fertility regulation in nursing women. VI. Contraceptive effectiveness of a subdermal progesterone implant. Contraception 1984;30:311–25.6509984
9 Díaz S, Jackanicz TM, Herreros C, et al. Fertility regulation in nursing women: VIII. Progesterone plasma levels and contraceptive efficacy of a progesterone-releasing vaginal ring. Contraception 1985;32:603–22.3912105
10 Shaaban MM. Contraception with progestogens and progesterone during lactation. J Steroid Biochem Mol Biol 1991;40:705–10.1835650
11 Díaz S, Zepeda A, Maturana X, et al. Fertility regulation in nursing women IX. Contraceptive performance, duration of lactation, infant gowth, and bleeding patterns during use of progesterone vaginal rings, progestin-only pills, Norplant® implants, and Copper T 380-A intrauterine devices. Contraception 1997;56:223–32.9408703
12 Chen JH, Wu SC, Shao WQ, et al. The comparative trial of TCu 380A IUD and progesterone-releasing vaginal ring used by lactating women. Contraception 1998;57:371–9.9693396
13 Massai R, Miranda P, Valdés P, et al. Preregistration study on the safety and contraceptive efficacy of a progesterone-releasing vaginal ring in Chilean nursing women. Contraception 1999;60:9–14.10549447
14 Roy M, Hazra A, Merkatz R, et al. Progesterone vaginal ring as a new contraceptive option for lactating mothers: Evidence from a multicenter non-randomized comparative clinical trial in India. Contraception 2020;102:159–67.32360666
15 Croxatto HB, Díaz S. Progesterone vaginal rings for contraception during breastfeeding. In: Runnebaum R, Rabe T, Kiesel L, eds. Advances in gynecological and obstetric research series Vol 2 Female contraception and male fertility regulation. New Jersey: Parthenon; 1987:135–42.
16 Sivin I, Díaz S, Croxatto HB, et al. Contraceptives for lactating women: A comparative trial of a progesterone-releasing vaginal ring and the copper T 380A IUD. Contraception 1997;55:225–32.9179454
17 Massai R, Quinteros E, Reyes MV, et al. Extended use of a progesterone-releasing vaginal ring in nursing women: A phase II clinical trial. Contraception 2005;72:352–7.16246661
18 Allen SS, Allen AM, Lunos S, et al. Progesterone and postpartum smoking relapse: A pilot double-blind placebo-controlled randomized trial. Nicotine Tob Res 2016;18:2145–53.27613934
19 Reisman T, Goldstein Z. Case report: Induced lactation in a transgender woman. Transgend Health 2018;3:24–6.29372185
20 Wamboldt R, Shuster S, Sidhu BS. Lactation induction in a transgender woman wanting to breastfeed: Case report. J Clin Endocrinol Metab 2021;106:e2047–e52.33513241
21 Weimer AK. Lactation induction in a transgender woman: Macronutrient analysis and patient perspectives. J Hum Lact 2023;39:488–94.37138506
22 Delgado D, Stellwagen L, McCune S, et al. Experience of induced lactation in a transgender woman: Analysis of human milk and a suggested protocol. Breastfeed Med 2023;18:888–93.37910800
23 van Amesfoort JE, Van Mello NM, van Genugten R. Lactation induction in a transgender woman: Case report and recommendations for clinical practice. Int Breastfeed J 2024;19:18.38462609
24 Trahair ED, Kokosa S, Weinhold A, et al. Novel lactation induction protocol for a transgender woman wishing to breastfeed: A case report. Breastfeed Med 2024;19:301–5.38535753
25 Ikebukuro S, Tanaka M, Kaneko M, et al. Induced lactation in a transgender woman: Case report. Int Breastfeed J 2024;19:66.39300546

## Substance Identification

### Substance Name

Progesterone

### CAS Registry Number

57-83-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Hormones

Progesterone Congeners